# Uva Ursi

## Drug Levels and Effects

### Summary of Use during Lactation

Uva ursi (Arctostaphylos uva-ursi) leaves contain arbutin, which is hydrolyzed to hydroquinone. Uva ursi has no specific lactation-related uses, but is most often used as a urinary antiseptic. No data exist on the excretion of any components of uva ursi into breastmilk or on the safety and efficacy of uva ursi in nursing mothers or infants. Uva ursi should generally be avoided during breastfeeding because of a lack of data and its potential toxicity.[1,2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Urinary Antiseptic) Methenamine Hippurate, Methenamine Mandelate, Nitrofurantoin

### References

1 Kopec K. Herbal medications and breastfeeding. J Hum Lact 1999;15:157-61.10578793
2 Nice F, Coghlan R, Birmingham B. Which herbals are safe to take while breastfeeding? Here's a guide to popular herbs and their potential risk to nurslings. US Pharm 2000;25:1-9.

## Substance Identification

### Substance Name

Uva Ursi

### Scientific Name

Arctostaphylos uva-ursi

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal

Anti-Infective Agents, Urinary